# Carbenicillin Indanyl Disodium

CASRN: 4697-36-3

## Drug Levels and Effects

### Summary of Use during Lactation

Carbenicillin indanyl disodium is no longer marketed. Limited information indicates that carbenicillin produces low levels in milk that are not expected to cause adverse effects in breastfed infants. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush have been reported with penicillins, but these effects have not been adequately evaluated. Carbenicillin indanyl disodium is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. Milk levels have not been reported after oral doses of carbenicillin. After a single 1 gram intramuscular dose of carbenicillin in 3 women, milk levels averaged between 0.1 and 0.24 mg/L over the first 6 hours after the dose. Peak milk levels occurred 4 hours after the intramuscular dose.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Matsuda S. Transfer of antibiotics into maternal milk. Biol Res Pregnancy Perinatol 1984;5:57-60.6743732

## Substance Identification

### Substance Name

Carbenicillin Indanyl Disodium

### CAS Registry Number

4697-36-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Penicillins